# Brentuximab Vedotin

CASRN: 914088-09-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of brentuximab vedotin during breastfeeding. Because brentuximab is a large protein molecule with a molecular weight of about 153,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] Vedotin (monomethyl auristatin E) is a small-molecule anticancer drug that might enter milk and be absorbed by the infant. The manufacturer recommends that breastfeeding be discontinued during brentuximab vedotin therapy.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Brentuximab Vedotin

### CAS Registry Number

914088-09-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal